# Carisoprodol

CASRN: 78-44-4

## Drug Levels and Effects

### Summary of Use during Lactation

If carisoprodol is required by the mother, it is not necessarily a reason to discontinue breastfeeding. Slight sedation has occurred in a breastfed newborn infant who was exposed during pregnancy and lactation; sedation might be more pronounced in newborns who are exposed for the first time during nursing. Other agents may be preferred, especially while nursing a newborn or preterm infant, or when other drugs that can cause sedation are used simultaneously.

### Drug Levels

Carisoprodol is metabolized almost entirely to meprobamate which contributes to the overall sedative effect. Carisoprodol has a half-life of 4 hours and meprobamate has a half-life of about 10 hours.[1]

Maternal Levels. A mother was taking carisoprodol 700 mg three times daily during pregnancy and lactation. Maternal trough breastmilk levels of carisoprodol and meprobamate were measured before the first morning dose on 4 consecutive days at steady-state (time postpartum not stated). Average minimum breastmilk levels were 0.9 mg/L for carisoprodol and 11.6 mg/L for meprobamate. The authors calculated that the minimum infant dose of the drug plus metabolite was 1.9 mg/kg daily or 4.1% of the maternal weight-adjusted dosage. Extrapolating these results to an average (rather than minimum) dose, the authors estimated that an exclusively breastfed infant would receive 3 mg/kg daily or 6% of the maternal weight-adjusted dosage.[1]

A woman who was suspected to have been abusing carisoprodol had the drug and meprobamate detectable in breastmilk for 2 consecutive days after hospitalization; only meprobamate was detectable on day 3.[2]

A woman took carisoprodol 700 mg orally four times daily at 4- to 6-hour intervals during pregnancy and lactation for spasms of the back muscles. At 1 week postpartum, breastmilk samples were obtained 2 and 3.5 hours after doses of the drug. Two hours after a dose, carisoprodol concentration in milk was 1.4 mg/L and meprobamate was 10.9 mg/L. At 3.5 hours after the following dose, carisoprodol concentration in milk was 0.8 mg/L and meprobamate was 17.1 mg/L. The authors estimated that the maximum intake of carisoprodol plus meprobamate was 2.7 mg/kg daily or 6.9% of the maternal weight-adjusted dosage.[3]

Infant Levels. A mother took carisoprodol 700 mg orally four times daily at 4- to 6-hour intervals during pregnancy and lactation. At 1 week postpartum, her exclusively breastfed infant had unmeasurable serum concentrations of carisoprodol (<2 mg/L) and meprobamate (<4 mg/L) 2 hours after nursing (3.5 hours after the mother's previous dose). The investigators hypothesized that either the dose received by the infant was low or the infant's metabolism of the drugs may have been stimulated from the exposure during pregnancy.[3]

### Effects in Breastfed Infants

A mother taking carisoprodol 700 mg plus propoxyphene 70 mg and acetaminophen 900 mg 3 times daily and partially breastfeeding her infant noticed no unusual behavior or adverse reactions in her infant. The infant grew normally and at 6 months of age, examination by a pediatrician found normal psychomotor development.[1]

A mother took carisoprodol 700 mg orally four times daily at 4- to 6-hour intervals during pregnancy and while exclusively nursing her newborn infant. Slight sedation of the infant was noted during the first month of life.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Nordeng H, Zahlsen K, Spigset O. Transfer of carisoprodol to breast milk. Ther Drug Monit 2001;23:298-300.11360042
2 Bailey DN, Briggs JR. Carisoprodol: An unrecognized drug of abuse. Am J Clin Pathol 2002;117:396-400.11888078
3 Briggs GG, Ambrose PJ, Nageotte MP, et al. High-dose carisoprodol during pregnancy and lactation. Ann Pharmacother 2008;42:898-901.18460586

## Substance Identification

### Substance Name

Carisoprodol

### CAS Registry Number

78-44-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscle Relaxants, Central